# Piperacillin

CASRN: 61477-96-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that piperacillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Piperacillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Piperacillin in a dosage of 4 grams intravenously every 8 hours for at least 3 days was given to 8 women. Milk levels were measured after 2 subsequent doses. After the first dose, milk levels ranged from 0.49 to 1.5 mg/L in the 3 hours after the dose. After the second dose, milk levels ranged from 1.1 to 1.9 mg/L in the 3 hours after the dose. Peak milk levels occurred 2 to 3 hours after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Baier R, Wolnik L, Puppel H, et al. Piperacillin concentrations in milk and serum from lactating women. Proc ICAAC 1982:203

## Substance Identification

### Substance Name

Piperacillin

### CAS Registry Number

61477-96-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins